# Clomiphene

CASRN: 911-45-5

## Drug Levels and Effects

### Summary of Use during Lactation

Clomiphene appeared in low amounts in milk in one woman. Several studies found that clomiphene suppresses lactation in women who did not want to breastfeed. It appears to act by lowering serum prolactin, especially the post-stimulation surge in serum prolactin. It is likely that clomiphene would interfere with lactation in a nursing mother.

### Drug Levels

Maternal Levels. A woman who was taking a clomiphene dose of 2.04 mg/kg daily collected 6 to 8 milk samples over a 24-hour period. The peak milk level was 583 mcg/L and the mean concentration was 300 mcg/L. Using the mean value, the absolute infant dose in a fully breastfed infant would be 45 mcg/kg daily and the relative infant dose would be 2.2% of the mother’s weight-adjusted dosage.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman who was taking clomiphene in a dose of 2.04 mg/kg daily partially breastfed her infant. She did not observe any adverse effects in her infant.[1]

### Effects on Lactation and Breastmilk

A double-blind study compared clomiphene in dosages of 50 mg daily for 10 days (n = 110), 100 mg daily for 5 days (n = 26) and placebo (n = 41) in their ability to suppress lactation and relieve pain and engorgement in nonnursing postpartum mothers. Both dosages of clomiphene were superior to placebo as reported by the women, but the 100 mg daily dosage was somewhat superior to the 50 mg daily dosage.[2]

A study compared clomiphene 100 mg daily for 5 days (n = 60) to placebo (n = 30) in suppressing lactation and symptoms of engorgement. Starting clomiphene within 12 hours of delivery was more effective in all measures than starting it 12 hours or more after delivery as judged by a physician observer; both treatments were more effective than mechanical measures alone such as breast binding.[3]

A randomized trial compared clomiphene 50 mg twice daily for 14 days (n = 15) to bromocriptine 2.5 mg twice daily for 14 days (n = 15), diethylstilbestrol 5 mg 3 times daily for 14 days (n = 15), testosterone propionate 75 mg intramuscularly once (n = 15), and placebo 3 times daily by mouth (n = 15) in their ability to reduce serum prolactin and lactation postpartum. After three days of treatment, serum prolactin was reduced to 65% of baseline by clomiphene compared to a drop to 35% in patients who received bromocriptine. Clomiphene was also less effective than bromocriptine in suppressing lactation and symptoms of engorgement.[4]

A study compared clomiphene 100 mg daily for 7 days (n = 10) to placebo (n = 12) started on the first day postpartum. Clomiphene was no more effective than placebo in suppressing lactation or reducing serum prolactin concentrations.[5]

Women in the first week postpartum who did not wish to breastfeed received either clomiphene 50 mg twice daily (n = 10) or placebo (n = 10). Women who received clomiphene did not experience a rise in serum prolactin from baseline values during use of a breast pump; those given placebo had the normal post-stimulation rise in serum prolactin.[6]

Eighty postpartum women were studied. Forty received clomiphene 50 mg twice daily for 5 days beginning the first day postpartum; 20 received clomiphene 50 mg twice daily for 5 days beginning the fourth day postpartum; and, 20 received placebo. All women receiving clomiphene experienced inhibition of lactation, and reductions in breast engorgement, discomfort and serum prolactin. Prolactin serum concentrations became statistically lower than baseline on day 3 for the women who were 1 day postpartum and on day 5 for those who were 4 days postpartum at the outset. Placebo did not suppress lactation nor suppress serum prolactin.[7]

### References

1 Monfort A, Jutras M, Martin B, et al. (2021). Simultaneous quantification of 19 analytes in breast milk by liquid chromatography-tandem mass spectrometry (LC-MS/MS). J Pharm Biomed Anal.
2 Zuckerman H, Carmel S. (1973). The inhibition of lactation by clomiphene. J Obstet Gynaecol Br Commonw.
3 Kalir R, David MP, Kraicer PF. (1975). Clomiphene citrate in suppression of puerperal lactation. Am J Obstet Gynecol.
4 Weinstein D, Ben-David M, Polishuk WZ. (1976). Serum prolactin and the suppression of lactation. Br J Obstet Gynaecol.
5 Canales ES, Lasso P, Soria J, et al. (1977). Effect of clomiphene on prolactin secretion and lactation in puerperal women. Br J Obstet Gynaecol.
6 Masala A, Delitala G, Lo Dico G, et al. (1977). Effect of clomiphene on release of prolactin induced by mechanical breast emptying in women post partum. J Endocrinol.
7 Masala A, Delitala G, Alagna S, et al. (1978). Clomiphene and puerperal lactation. Panminerva Med.

## Substance Identification

### Substance Name

Clomiphene

### CAS Registry Number

911-45-5

### Drug Class

Breast Feeding

Lactation

Estrogen Antagonists

Fertility Agents

Female, Selective Estrogen Receptor Modulators